# Ferric Derisomaltose

CASRN: 1345510-43-1

## Drug Levels and Effects

### Summary of Use during Lactation

Limited data indicate that breastmilk iron is increased 3 days after an intravenous infusion of ferric derisomaltose (formerly called iron isomaltoside), but levels remain within the normal range. By 7 days after the dose, breastmilk iron levels were similar to that of mothers taking oral iron. Ferric derisomaltose appears to be acceptable to use in nursing mothers with no special precautions required. For additional information on iron use during breastfeeding, see the monograph on Iron Salts.

### Drug Levels

Maternal Levels. Thirty women with postpartum anemia were given intravenous ferric derisomaltose 1200 mg in a single intravenous dose over 15 minutes. They were compared to 35 women with postpartum anemia who took 100 mg of oral iron once or twice daily. Breastmilk samples were taken before treatment, 3 (range 2 to 4) days and again at 7 (range 6 to 8) days after the intravenous iron dose. At the 3-day point, the average breastmilk iron concentration was 0.72 mg/L in the IV iron group and 0.4 mg/L in the oral iron group, which was significantly different. At the 7-day point, the average breastmilk iron concentration was 0.47 mg/L in the IV iron group and 0.44 mg/L in the oral iron group, which was not significantly different.[1]

A study in Japan of women with postpartum hemorrhage gave ferric derisomaltose in a dose determined by a formula for iron need. The cumulative total iron dose in 1 or 2 doses was 1000 mg in 6 patients, 1500 mg in 14 patients, and 2000 mg in 1 patient. Breastmilk iron concentrations were in the normal range for the 21 women tested, with an average concentration of 0.98 mg/L on day 4 after the infusion falling to 0.66 mg/L by day 15.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In a randomized, nonblinded study, randomly assigned to receive either a single intravenous dose of 1200 mg ferric derisomaltose (iron isomaltoside; n = 97) or oral iron 40 to 50 mg oral iron daily or 100 mg oral iron one or two times daily (n = 99). There was no significant difference between groups in the median time to lactogenesis, nor in the time of discontinuation of breastfeeding among those who weaned their infants.[3]

A study in Japan of women with postpartum hemorrhage gave ferric derisomaltose in a dose determined by a formula for iron need. The cumulative total iron dose in 1 or 2 doses was 1000 mg in 6 patients, 1500 mg in 14 patients, and 2000 mg in 1 patient. Adverse reactions occurred in 5 of 21 breastfed neonates and included neonatal jaundice, hydrocele, anal fissure, and diaper dermatitis diaper. With the exception of neonatal jaundice, all events were mild; none were severe and none appeared to be directly related to ferric derisomaltose.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ferric Carboxymaltose, Iron Sucrose

### References

1 Holm C, Thomsen LL, Norgaard A, et al. Iron concentration in breast milk normalised within one week of a single high-dose infusion of iron in randomised controlled trial. Acta Paediatr 2017;106:256-60.27883237
2 Sugimura M, Ohtani Y, Tamai S, et al. Ferric derisomaltose for the treatment of iron deficiency anemia with postpartum hemorrhage: Results of a single-arm, open-label, phase 3 study in Japan. J Obstet Gynaecol Res 2023;49:946-55.36653310
3 Holm C, Thomsen LL, Norgaard A, et al. Single-dose intravenous iron infusion or oral iron for treatment of fatigue after postpartum haemorrhage: A randomized controlled trial. Vox Sang 2017;112:219-28.28198084

## Substance Identification

### Substance Name

Ferric Derisomaltose

### CAS Registry Number

1345510-43-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Ferric Compounds

Hematinics

Iron Compounds